# Tavaborole

CASRN: 174671-46-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Topical tavaborole has not been studied during breastfeeding. Because blood levels are very low after topical application to the toenails, it is unlikely that a measurable amount of the drug will enter the breastmilk.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ciclopirox, Efinaconazole, Terbinafine

## Substance Identification

### Substance Name

Tavaborole

### CAS Registry Number

174671-46-6

### Drug Class

- Breast Feeding
- Lactation
- Anti-Infective Agents
- Antifungal Agents